# Eletriptan

CASRN: 143322-58-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that a maternal dose of eletriptan up to 80 mg daily produces low levels in milk and would not be expected to cause any adverse effects in breastfed infants. Eletriptan has been recommended as a triptan of choice in breastfeeding.[1] Painful, burning nipples and breast pain have been reported after doses of sumatriptan and other triptans. This has occasionally been accompanied by a decrease in milk production.

### Drug Levels

Eletriptan is metabolized to an active metabolite that has a longer half-life than eletriptan, but its serotonin agonist activity is only about 10% that of eletriptan.

Maternal Levels. Eight lactating women who were at least 1 month postpartum were given a single 80 mg oral dose of eletriptan. An average of 12.9 mcg was excreted in the 24 hours after the dose. At 24 hours, breastmilk levels averaged 1.7 mcg/L. The half-life in milk of eletriptan was 3.6 hours.[2] The active metabolite was not measured in breastmilk.

Three women who were at least 1 month postpartum used eletriptan to treat migraine provided one milk sample before the dose, then additional milk samples at 1, 2, 4, 8, 12 and 24 hours after the dose. Desmethyleletriptan was undetectable (<1 nM) in milk. One mother took a 20 mg dose. The peak milk level of 18.2 mcg/L occurred 2 hours after the dose. The average milk level was 5.7 mcg/L and the half-life in milk was 4 hours. Her infant’s daily dosage of eletriptan was 0.9 mcg/kg and the weight-adjusted infant dosage was 0.3% of the maternal dose. The two other women took a 40 mg dose. Peak milk levels of 78.1 and 102.4 mcg/L occurred at 2 hours after the dose and the half-lives in milk were 5.1 and 3.7 hours, respectively. The average milk levels were 24 and 23.5 mcg/L, respectively. Their infants’ daily dosages of eletriptan were 3.6 and 3.5 mcg/kg and their weight-adjusted infant dosages were 0.6% and 0.8% of the maternal dose. The overall average infant dosage was 0.6% of the maternal weight-adjusted dosage.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A review of four European adverse reaction databases found 26 reported cases of painful, burning nipples, painful breasts, breast engorgement and/or painful milk ejection in women who took a triptan while nursing. Pain was sometimes intense and occasionally led to decreased milk production. Pain generally subsided with time as the drug was eliminated. The authors proposed that triptans may cause vasoconstriction of the arteries in the breast, nipples, and the arteries surrounding the alveoli and milk ducts, causing a painful sensation and a painful milk ejection reﬂex.[4]

### Alternate Drugs to Consider

Rizatriptan, Sumatriptan, Zolmitriptan

### References

1 Ornello R, Maassen van den Brink A, Puledda F, et al. Migraine management during pregnancy, breastfeeding and in women planning pregnancy. Cephalalgia 2025;45:3331024251393945.41263702
2 Research FDA Center for Drug Evaluation and. NDA 21-016. Clinical pharmacology and biopharmaceutics reviews. [Accessed 1/25/2020]. 2002:8–9. https://www.accessdata.fda.gov/drugsatfda_docs/nda/2002/21016_Relpax_BioPharmr.pdf
3 Amundsen S, Nordeng H, Fuskevåg OM, et al. Transfer of triptans into human breast milk and estimation of infant drug exposure through breastfeeding. Basic Clin Pharmacol Toxicol 2021;128:795–804.33730376
4 Conijn M, Maas V, van Tuyl M, et al. Breastfeeding-related adverse drug reactions of triptans: A descriptive analysis using four pharmacovigilance databases. Breastfeed Med 2024;19:645–51.38563407

## Substance Identification

### Substance Name

Eletriptan

### CAS Registry Number

177834-92-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Serotonin Receptor Agonists

Serotonin 5-HT1 Receptor Agonists

Triptans

Vasoconstrictor Agents